# Acamprosate

CASRN: 77337-76-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of acamprosate during breastfeeding. Based on its chemical properties it is likely to enter milk. However, the oral bioavailability of acamprosate is only 11%, so systemic effects in the breastfed infant are unlikely. If acamprosate is required by the mother, it is not a reason to discontinue breastfeeding. Monitor the breastfed infant for diarrhea.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Naltrexone

## Substance Identification

### Substance Name

Acamprosate

### CAS Registry Number

77337-76-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Alcohol Deterrents

Central Nervous System Agents